# Amphetamine

CASRN: 300-62-9

## Drug Levels and Effects

### Summary of Use during Lactation

In dosages prescribed for medical indications, some evidence indicates that amphetamine does not affect nursing infants adversely. The effect of amphetamine in milk on the neurological development of infants has not been well studied. Large dosages of amphetamine might interfere with milk production, especially in women whose lactation is not well established. Although most manufacturers advise that mothers not breastfeed while taking amphetamine, some experts state that therapeutic dosages of amphetamine can be used during nursing with monitoring of the infant for irritability, insomnia, and feeding difficulty.[1] Breastfeeding is generally discouraged in mothers who are actively abusing amphetamines.[2–4]

### Drug Levels

Maternal Levels. A nursing woman was taking racemic amphetamine 5 mg orally 4 times daily at 10 am, noon, 2 pm and 4 pm for narcolepsy. Trough milk levels of 55 and 68 mcg/L were found before the 10 am dose on days 10 and 42 postpartum, respectively. Milk levels were 118 and 138 mcg/L before the 2 pm doses on days 10 and 42, respectively.[5]

A woman took 35 mg of amphetamine daily for narcolepsy and exclusively breastfed her infant for 6 months. Breastmilk samples were taken just before her morning dose at 2, 5 and 9 weeks postpartum. Breastmilk levels of amphetamine were 74, 82 and 82 mcg/L, respectively. These values represent a weight-adjusted dosage of 1.9% to 2.1% of the maternal dosage and an absolute infant dosage of 11.1 to 12.4 mcg/kg daily.[6]

Infant Levels. Amphetamine was measured in a 12-hour urine collection in a breastfed infant whose mother was taking racemic amphetamine 5 mg 4 times daily. The infant’s urinary excretion of amphetamine ranged from 0.1 to 0.3% of the mother’s urinary excretion.[5]

The infant of a mother who was taking amphetamine 35 mg daily for narcolepsy during pregnancy and postpartum was exclusively breastfed for 6 months. Infant blood samples were taken just before the mother’s morning amphetamine dose at 2, 5 and 9 weeks postpartum. Infant serum concentrations at these times were 3.1, 2 and 1.4 mcg/L, respectively. These values represented 15%, 7% and 5% of simultaneous maternal serum concentrations.[6]

### Effects in Breastfed Infants

One infant whose mother was being treated for narcolepsy with racemic amphetamine 5 mg 4 times daily was exposed to the drug in milk for the (unspecified) duration of breastfeeding. There were no signs of abnormal development during the first 2 years of life.[5]

The infant of a mother who was taking amphetamine 35 mg daily for narcolepsy during pregnancy and postpartum was exclusively breastfed for 6 months. The infant experienced no adverse reactions and grew normally.[6]

A prospective study followed 13 women who were taking an amphetamine (7 mixed racemic amphetamine salts [Adderal] and 6 lisdexamfetamine) during breastfeeding (9 exclusively). Median age of the child at the follow-up was 18 (IRQ 5.25 to 34) months. Adverse effects were reported among 5 children: somnolence in 1, crying or restlessness in 3, and colic or constipation in 4. All children were reported to have normal gross motor development, based on the Denver developmental scale. Neurodevelopment was also normal with median PEDsQL score of 97.16, psychosocial health score 99.33 and physical health score 98.75.[7]

### Effects on Lactation and Breastmilk

In 2 papers by the same authors, 20 women with normal physiologic hyperprolactinemia were studied on days 2 or 3 postpartum. Eight received dextroamphetamine 7.5 mg intravenously, 6 received 15 mg intravenously and 6 who served as controls received intravenous saline. The 7.5 mg dose reduced serum prolactin by 25 to 32% compared to control, but the difference was not statistically significant. The 15 mg dose significantly decreased serum prolactin by 30 to 37% at times after the infusion. No assessment of milk production was presented.[8,9] The authors also quoted data from another study showing that a 20 mg oral dose of dextroamphetamine produced a sustained suppression of serum prolactin by 40% in postpartum women. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a retrospective Australian study, mothers who used intravenous amphetamines during pregnancy were less likely to be breastfeeding their newborn infants at discharge than mothers who abused other drugs (27% vs 42%). The cause of this difference was not determined.[10]

A mother took amphetamine 35 mg daily for narcolepsy during pregnancy and postpartum. She exclusively breastfed her infant for 6 months with no evidence of an adverse effect on milk production.[6]

### Alternate Drugs to Consider

(ADHD) Dextroamphetamine, Lisdexamfetamine, Methylphenidate (Narcolepsy) Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

### References

1 Scoten O, Tabi K, Paquette V, . Attention-deficit/hyperactivity disorder in pregnancy and the postpartum period. Am J Obstet Gynecol 2024;231:19–35 38432409
2 Oei JL, Kingsbury A, Dhawan A, . Amphetamines, the pregnant woman and her children: A review. J Perinatol 2012;32:737–47 22652562
3 AAP Section on Breastfeeding. Breastfeeding and the use of human milk. Pediatrics 2012;129:e827–41 22371471
4 Wong S, Ordean A, Kahan M. SOGC clinical practice guidelines: Substance use in pregnancy: No. 256, April 2011. Int J Gynaecol Obstet 2011;114:190–202 21870360
5 Steiner E, Villen T, Hallberg M, . Amphetamine secretion in breast milk. Eur J Clin Pharmacol 1984;27:123–4 6489423
6 Öhman I, Wikner BN, Beck O, . Narcolepsy treated with racemic amphetamine during pregnancy and breastfeeding. J Hum Lact 2015;31:374–6 25948577
7 Hazan A, Kaduri NB, De-Haan T, . I am a law student treated with amphetamines for attention deficit hyperactive disorder (ADHD): Can I breastfeed my child? A pilot study. Neurotoxicol Teratol 2023;98:15.doi:10.1016/j.ntt.2023.107219
8 DeLeo V, Cella SG, Camanni F, . Prolactin lowering effect of amphetamine in normoprolactinemic subjects and in physiological and pathological hyperprolactinemia. Horm Metab Res 1983;15:439–43 6642414
9 Petraglia F, De Leo V, Sardelli S, . Prolactin changes after administration of agonist and antagonist dopaminergic drugs in puerperal women. Gynecol Obstet Invest 1987;23:103–9 3583091
10 Oei J, Abdel-Latif ME, Clark R, . Short-term outcomes of mothers and infants exposed to antenatal amphetamines. Arch Dis Child Fetal Neonatal Ed 2010;95:F36–F41 19679891

## Substance Identification

### Substance Name

Amphetamine

### CAS Registry Number

300-62-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Central Nervous System Stimulants

Dopamine Agents

Sympathomimetics

Wakefulness-Promoting Agents